# Entacapone

CASRN: 130929-57-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of entacapone during breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Entacapone

### CAS Registry Number

130929-57-6

### Drug Class

- Breastfeeding
- Lactation
- Antiparkinson Agents
- Catechol O-Methyltransferase Inhibitors